# Somatrogon

CASRN: 1663481-09-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because somatrogon is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. However, there is no published experience with somatrogon during breastfeeding, so an alternate drug may be preferred, especially while nursing a newborn or preterm infant. The closely related recombinant human growth hormone, somatropin, has been reported to increase milk production.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Somatropin

## Substance Identification

### Substance Name

Somatrogon

### CAS Registry Number

1663481-09-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Human Growth Hormone